# Prochlorperazine

CASRN: 58-38-8

## Drug Levels and Effects

### Summary of Use during Lactation

Based on minimal excretion of other phenothiazine derivatives, it appears that occasional short-term use of prochlorperazine for the treatment of nausea and vomiting poses little risk to the breastfed infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Galactorrhea has been reported with prochlorperazine.[1] Hyperprolactinemia appears to be the cause of the galactorrhea.[2-4]The hyperprolactinemia is caused by the drug's dopamine-blocking action in the tuberoinfundibular pathway.[5]The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Hooper JH, Jr, Welch VC, Shackelford RT. Abnormal lactation associated with tranquilizing drug therapy. JAMA 1961;178:506-7 14448766
2 Turkington RW. Prolactin secretion in patients treated with various drugs: Phenothiazines, tricyclic antidepressants, reserpine, and methyldopa. Arch Intern Med 1972;130:349-54 4560178
3 Turkington RW. Serum prolactin levels in patients with gynecomastia. J Clin Endocrinol Metab 1972;34:62-6 5061776
4 Meltzer HY, Fang VS. The effect of neuroleptics on serum prolactin in schizophrenic patients. Arch Gen Psychiatry 1976;33:279-86 1259521
5 Maguire GA. Prolactin elevation with antipsychotic medications: Mechanisms of action and clinical consequences. J Clin Psychiatry 2002;63 (Suppl 4):56-62 11913677

## Substance Identification

### Substance Name

Prochlorperazine

### CAS Registry Number

58-38-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiemetics

Phenothiazines

Gastrointestinal Agents